# Siponimod

CASRN: 1230487-00-9

## Drug Levels and Effects

### Summary of Use during Lactation

Although siponimod is 99.9% bound to plasma proteins and unlikely to reach the breastmilk in large amounts, it has a slow clearance and long half-life and is potentially toxic to the breastfed infant. Some guidelines recommend avoiding ozanimod during breastfeeding because of a lack of data;[1-3] however, the manufacturer's labeling does not recommend against the use of siponimod in breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Multiple Sclerosis) Glatiramer, Immune Globulin, Interferon beta, Methylprednisolone, Natalizumab, Ocrelizumab, Ofatumumab, Peginterferon beta

### References

1 Torres J, Chaparro M, Julsgaard M, et al. European Crohn's and Colitis Guidelines on Sexuality, Fertility, Pregnancy, and Lactation. J Crohns Colitis 2023;17:1–27.36005814
2 Capone F, Albanese A, Quadri G, et al. Disease-modifying drugs and breastfeeding in multiple sclerosis: A narrative literature review. Front Neurol 2022;13:851413.35493841
3 Shipley J, Beharry J, Yeh W, et al. Consensus recommendations on multiple sclerosis management in Australia and New Zealand: part 2. Med J Aust 2025;222:365–71.39923190

## Substance Identification

### Substance Name

Siponimod

### CAS Registry Number

1230487-00-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Immunosuppressive Agents

Sphingosine 1 Phosphate Receptor Modulators